# Colloidal Silver

CASRN: 7440-22-4

## Drug Levels and Effects

### Summary of Use during Lactation

Silver concentrations have not been measured in breastmilk after maternal ingestion of colloidal silver, but trace amounts of silver can be found in breastmilk from environmental sources. Long-term oral use of colloidal silver can lead to argyria, a permanent gray discoloration of the skin. It is not known if argyria could occur in a breasted infant. Since colloidal silver has no proven medical benefit, it should not be used during breastfeeding.

### Drug Levels

Maternal Levels. Silver can be found in some normal breastmilk samples, but in widely varying concentrations from undetectable to 42 mcg/L. The amount varies within studies and between studies, probably as a result of different populations’ exposures and different analytic techniques.[1-4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Sun Z, Yue B, Yang Z, et al. [Determination of 24 minerals in human milk by inductively coupled plasma mass spectrometry with microwave digestion]. Wei Sheng Yan Jiu 2013;42:504–9.23805536
2 Krachler M, Prohaska T, Koellensperger G, et al. Concentrations of selected trace elements in human milk and in infant formulas determined by magnetic sector field inductively coupled plasma-mass spectrometry. Biol Trace Elem Res 2000;76:97–112.11049226
3 Wappelhorst O, Kuhn I, Heidenreich H, et al. Transfer of selected elements from food into human milk. Nutrition 2002;18:316–22.11934544
4 Abdulrazzaq YM, Osman N, Nagelkerke N, et al. Trace element composition of plasma and breast milk of well-nourished women. J Environ Sci Health A Tox Hazard Subst Environ Eng 2008;43:329–34.18205064

## Substance Identification

### Substance Name

Colloidal Silver

### CAS Registry Number

7440-22-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Elements

Metals, Heavy

Transition Elements